# Dichloralphenazone

CASRN: 480-30-8

## Drug Levels and Effects

### Summary of Use during Lactation

Short-term or occasional use of dichloralphenazone during breastfeeding is unlikely to adversely affect the breastfed infant, especially if the infant is older than 2 months. Because the active metabolite, trichloroethanol, has a long half-life, long-term use of repeated doses during breastfeeding could result in infant sedation, especially while nursing a neonate or preterm infant. The low doses of dichloralphenazone found in combination migraine products (e.g., Midrin) are less likely to cause drowsiness in the infant unless doses are repeated several times daily. The antipyrine component of dichloralphenazone is considered unlikely to harm the infant.[1,2] Monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Dichloralphenazone is a chemical combination of chloral hydrate (64%) and antipyrine (36%).

Maternal Levels. After 1.3 grams of dichloralphenazone (equivalent to about 830 mg of chloral hydrate) daily in a woman who was 5 months postpartum, milk trichloroethanol levels were found to range from 1.3 to 3.2 mg/L.[3]

Antipyrine was given to 7 lactating women were 2 to 19 months postpartum. Each woman drank a single oral dose of 18 mg/kg of antipyrine in solution. Peak milk levels usually occurred 10 minutes after ingestion and ranged from about 10 to 30 mg/L. The antipyrine half-life in milk averaged 11.6 hours (range 5.7 to 21.7 hours). The authors estimated that a fully breastfed infant would ingest 6.4 mg of antipyrine after this maternal dose or 0.59% of the maternal dose (not weight-adjusted). Two of the women who were studied before and after pregnancy indicated that antipyrine clearance might be increased by about two-fold during lactation.[1] The time course of antipyrine appearance in milk is probably slower than above from dichloralphenazone in a tablet formulation.

Infant Levels. After a 1.3 gram maternal dose of dichloralphenazone (equivalent to about 1 gram of chloral hydrate), trichloroethanol was detected in her 5-month-old breastfed infant's plasma 21 hours later.[3]

### Effects in Breastfed Infants

Minimal morning sedation occurred in a 5-month-old breastfed infant whose mother was taking 1.3 grams of dichloralphenazone (equivalent to about 1 gram of chloral hydrate) every evening plus chlorpromazine 100 mg 3 times daily. The infant's overall development was said to be normal at 3 months of age.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Eletriptan, Rizatriptan, Sumatriptan, Zolmitriptan

### References

1 Berlin CM, Jr, Vesell S. Antipyrine disposition in milk and saliva of lactating women. Clin Pharmacol Ther 1982;31:38-44.7053302
2 Reed CB. A study of the conditions that require removal of the child from the breast. Surg Gynecol Obstet 1908;6:514-27.
3 Lacey JH. Dichloralphenazone and breast milk. Br Med J 1971;4:684.5134581

## Substance Identification

### Substance Name

Dichloralphenazone

### CAS Registry Number

480-30-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Inflammatory Agents, Non-Steroidal

Hypnotics and Sedatives